# Etelcalcetide

CASRN: 1262780-97-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on etelcalcetide during breastfeeding. Because etelcalcetide is a large molecule with a molecular weight of 1047.5 Da, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be avoided during use. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cinacalcet

## Substance Identification

### Substance Name

Etelcalcetide

### CAS Registry Number

1262780-97-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Calcium-Regulating Hormones and Agents

Calcimimetic Agents